# Pemirolast

CASRN: 69372-19-6

## Drug Levels and Effects

### Summary of Use during Lactation

Pemirolast is no longer marketed in the United States. Although no published data exist on the use of pemirolast during lactation, maternal milk levels are likely to be very low after the use eye drops. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Pemirolast

### CAS Registry Number

69372-19-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Allergic Agents

Histamine Antagonists